# Voriconazole

CASRN: 137234-62-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of voriconazole during breastfeeding. If voriconazole is required by the mother, it is not a reason to discontinue breastfeeding. Until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clotrimazole, Fluconazole, Miconazole, Nystatin

## Substance Identification

### Substance Name

Voriconazole

### CAS Registry Number

137234-62-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents